# Cardamom

## Drug Levels and Effects

### Summary of Use during Lactation

Cardamom (Elettaria cardamomum) seed oil contains primarily alpha-terpinyl acetate and 1,8-cineole, with lower amounts of alpha-phellandrene, alpha-pinene, alpha-terpineol, beta-pinene, bisabolene, borneol, camphene, 1,4-cineole, citronellol, geraniol, limonene, linalool, linalyl acetate, myrcene, nerolidol, p-cymene, sabinene, and terpinene. Cardamom has been used during breastfeeding as a treatment for infant colic, and as a galactogogue as part of an herbal mixture with some literature support for these uses.[1-3] It has also been used as a postpartum tonic in Sri Lanka with antioxidant and anti-inflammatory activity attributed to its 1,8-cineole content.[4]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A commercial preparation containing wild asparagus 2 grams, dill 1.5 grams, cumin 1 gram, and cardamom 0.5 grams (Ayush-SS granules, Central Council for Research Ayurveda & Siddha, India) per dose was studied in a randomized double-blind trial in Indian mothers whose infants were experiencing “insufficient lactation”. This dose was given twice daily for 12 weeks beginning when full-term infants failed to regain their birth weight by 14 days postpartum, exhibited a weight gain of less than 20 grams daily between days 15 and 90 of life, or had fewer than six urinations per day. A per-protocol analysis (dropout rate 22%) found that at six months, 74 of 106 (70%) infants in the Ayush-SS group were exclusively breastfed, compared to 47 of 105 (45%) in the placebo group. After 90 days, 81 of 106 infants (77%) in the Ayush-SS group gained at least 20 grams per day compared to 44 of 105 (41.8%) in the placebo group. Maternal perceptions of insufficient lactation were lower in the Ayush-SS group (15% vs. 58%). All of these differences were statistically significant. No severe adverse events related to the intervention were observed.[3] The study was well designed and performed, but no intent-to-treat analysis was performed.

### References

1 Stapleton H. The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery 1995;1:165-7.9456733
2 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54-8.19161049
3 Saxena U, Ota S, Rajput S, et al. Clinical evaluation of Ayush-SS granules in exclusively breastfeeding mothers with insufficient lactation: A randomized, double-blind, placebo-controlled trial. Int Breastfeed J 2025;20:26.40188102
4 Wakkumbura H, Yahathugoda D, Attanayake D. The evaluation of the antioxidant effect of indigenous herbal formula (Kayam hodda) from different provinces of Sri Lanka in the management of postpartum complications. Journal of South Asian Federation of Obstetrics and Gynaecology 2024;16:650-7. doi:10.5005/jp-journals-10006-254

## Substance Identification

### Substance Name

Cardamom

### Scientific Name

Elettaria cardamomum Maton

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal